# Modafinil

CASRN: 68693-11-8

## Drug Levels and Effects

### Summary of Use during Lactation

Little information is available on the excretion of modafinil into breastmilk. In the case reports available, only R-modafinil was measured. R-enantiomer is the predominant form (about 75%) in the blood after administration of racemic modafinil, but not measuring S-modafinil in those reports likely led to an underreporting of the total amount in milk and exposure in the infant.[1,2] Nevertheless, milk levels of R-modafinil in two nursing mothers and serum of one breastfed infant were very low. Some information from women who breastfed their infants while using modafinil found no adverse effects in the infants. Until more safety data are available, modafinil should be used with careful infant monitoring during breastfeeding, or an alternate drug may be preferred.

### Drug Levels

Modafinil is a mixture of equal parts of R- and S-modafinil; R-modafinil alone is also available as armodafinil. The two isomers have equal potency, but the R-isomer has a longer half-life and therefore predominates in plasma at ratio of about 3 to 1. No interconversion between the two isomers occurs.

Maternal Levels. A woman with idiopathic hypersomnolence was treated with racemic modafinil 250 mg daily. She was also taking 75 mcg of levothyroxine daily for Hashimoto's thyroiditis, sertraline 200 mg daily for obsessive-compulsive and major depressive disorders, and inhaled albuterol as needed for mild intermittent asthma. At 19 days postpartum, milk samples were collected at 0, 1, 2, 4, 6, 8, 10, 12, and 24 hours after the dose. The trough milk R-modafinil level was 0.43 mg/L, with peak value of 2.3 mg/L at 2 hours after the dose. Based on the average amount of R-modafinil in milk of 1.2 mg/L, the daily infant dosage was estimated to be 0.18 mg/kg. All of these values may be underestimates of the pharmacologically active total drug (both R- and S-enantiomers), because S-modafinil was not measured.[3]

A nursing mother with narcolepsy was taking racemic modafinil 300 mg in the morning and 100 mg at noon. Eight milk samples were collected over a 26-hour period and the active isomer, armodafinil, was measured in milk. The peak milk concentrations of R-modafinil 3.89 and 4.07 mg/L occurred about 2 and 4 hours after the morning dose on the two days, respectively. The lowest milk level was 0.92 mg/L just before the dose on day 2. The authors estimated the R-modafinil infant dosage for a fully breastfed infant to be 294 mcg/kg daily. All of these values may be underestimates of the pharmacologically active total drug (both R- and S-enantiomers) because S-modafinil was not measured.[1,2,4]

Infant Levels. A nursing mother with narcolepsy was taking modafinil 300 mg in the morning and 100 mg at noon. Her exclusively breastfed infant had a blood sample taken 110 minutes after the morning dose (and 30 minutes after breastfeeding was started), which was 0.19 mg/L, which was 1.6% of the mother’s simultaneous plasma level; however this may be an underestimate of the pharmacologically active total drug (both R- and S-enantiomers) because S-modafinil was not measured.[1,4]

### Effects in Breastfed Infants

In one case-control study of women having narcolepsy with cataplexy, some women (fewer than 6) breastfed their infants while taking modafinil. No adverse effects were noted. The authors felt that the risk from the medication is low.[5]

An infant was exclusively breastfed by a mother taking modafinil 300 mg in the morning and 100 mg at noon. The authors state that the infant had no adverse events during the 2-day study period and normal growth and development at 6 weeks postpartum.[4]

### Effects on Lactation and Breastmilk

A case control study comparing women with narcolepsy with cataplexy to a control group found that those with narcolepsy breastfed longer than those without the disease. The authors felt that the difference likely due to a lower employment rate among the women with narcolepsy.[5]

### Alternate Drugs to Consider

(Narcolepsy) Amphetamine, Armodafinil, Dextroamphetamine, Lisdexamfetamine, Methylphenidate, Oxybate Salts, Pitolisant

### References

1 Anderson PO. Armodafinil in milk. J Hum Lact 2023;39:223.37073877
2 Leggett C, Ritchie U, Costi L, et al. Response to Dr. Anderson's letter to the editor: Modafinil and armodafinil in human milk. J Hum Lact 2023;39:224-5.
3 Aurora S, Aurora N, Datta P, et al. Evaluating transfer of modafinil into human milk during lactation: A case report. J Clin Sleep Med 2018;14:2087-9.30518447
4 Leggett C, Ritchie U, Costi L, et al. Infant exposure to armodafinil through human milk following maternal use of modafinil. J Hum Lact 2022;39:218-22.36384330
5 Calvo-Ferrandiz E, Peraita-Adrados R. Narcolepsy with cataplexy and pregnancy: A case-control study. J Sleep Res 2018;27:268-72.28568319

## Substance Identification

### Substance Name

Modafinil

### CAS Registry Number

68693-11-8

### Drug Class

Breast Feeding

Lactation

Milk, Human

Central Nervous System Stimulants

Wakefulness-Promoting Agents